# Cyclizine

CASRN: 82-92-8

## Drug Levels and Effects

### Summary of Use during Lactation

Occasional doses of cyclizine are probably acceptable during breastfeeding. Large doses or more prolonged use may cause effects in the infant or decrease the milk supply, particularly in combination with a sympathomimetic such as pseudoephedrine or before lactation is well established.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information on cyclizine was not found as of the revision date. In one telephone follow-up study, mothers reported irritability and colicky symptoms 10% of infants exposed to various antihistamines and drowsiness was reported in 1.6% of infants. None of the reactions required medical attention and none of the infants were exposed to cyclizine.[1]

### Effects on Lactation and Breastmilk

Antihistamines in relatively high doses given by injection can decrease basal serum prolactin in nonlactating women and in early postpartum women.[2,3] However, suckling-induced prolactin secretion is not affected by antihistamine pretreatment of postpartum mothers.[2] Whether lower oral doses of antihistamines have the same effect on serum prolactin or whether the effects on prolactin have any consequences on breastfeeding success have not been studied. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Dimenhydrinate

### References

1 Ito S, Blajchman A, Stephenson M, et al. (1993). Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol.
2 Messinis IE, Souvatzoglou A, Fais N, et al. (1985). Histamine H1 receptor participation in the control of prolactin secretion in postpartum. J Endocrinol Invest.
3 Pontiroli AE, De Castro e Silva E, Mazzoleni F, et al. (1981). The effect of histamine and H1 and H2 receptors on prolactin and luteinizing hormone release in humans: Sex differences and the role of stress. J Clin Endocrinol Metab.

## Substance Identification

### Substance Name

Cyclizine

### CAS Registry Number

82-92-8

### Drug Class

Breast Feeding

Lactation

Antiemetics

Antihistamines

Anti-Allergic Agents

Gastrointestinal Agents